# Japanese Encephalitis Vaccine

## Drug Levels and Effects

### Summary of Use during Lactation

Data concerning the safety of Japanese encephalitis vaccine during breastfeeding are not available. However, the Centers for Disease Control and Prevention and several health professional organizations state that in general vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants. Therefore, breastfeeding is not a contraindication to Japanese encephalitis vaccine in mothers who require it. Breastfed infants should be vaccinated according to the routine recommended schedules.[1-3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Limited data indicate that breastfeeding can enhance the response of the infant to certain vaccine antigens.[1,4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, et al. CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Hills SL, Walter EB, Atmar RL, et al. Japanese encephalitis vaccines: Recommendations of the Advisory Committee on Immunization Practices. MMWR Recomm Rep 2019;68:1–33.31518342
3 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661–78.41712936
4 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991–5.9380478

## Substance Identification

### Substance Name

Japanese Encephalitis Vaccine

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines